# Rivaroxaban

CASRN: 366789-02-8

## Drug Levels and Effects

### Summary of Use during Lactation

Several case reports, a thorough pharmacokinetic analysis, and a pharmacokinetic computer model consistently indicate that maternal doses of rivaroxaban of 15 to 30 mg daily produce low levels in milk that are considerably below doses (7% or less) required for anticoagulation in infants. Plasma rivaroxaban levels in two breastfed infants were undetectable. If the mother requires rivaroxaban, it is not a reason to discontinue breastfeeding.[1,2]

### Drug Levels

Maternal Levels. A 40-year-old woman developed bilateral pulmonary embolism and peripartum cardiomyopathy following cesarean section. She initially received enoxaparin, but was switched to oral rivaroxaban 15 mg twice daily after 2 days. On day 3 of rivaroxaban, complete milk collections from both breasts were obtained before and at 3, 6, and 10 hours after the morning dose. Blood samples were taken at the same times. The authors calculated that a fully breastfed infant would receive 2.4 mcg/kg over the 10-hour period, which would be 1.3% of the maternal weight-adjusted dosage.[3]

A 38-year-old woman with antiphospholipid syndrome began rivaroxaban 15 mg (0.19 mg/kg) daily at 5 days postpartum for prophylaxis of deep vein thrombosis. On two separate days, 7 samples of milk were taken over a 24-hour period. Values were similar at the same times on each day. A mean peak value of 53.9 mcg/L occurred at 6 hours after the dose and the average milk concentration was 22.7 mcg/L. The half-life in milk was 4.7 hours. The estimated daily dose that a fully breastfed infant would receive was 3.4 mcg/kg daily, which corresponded to 1.8% of the maternal weight-adjusted dosage.[4]

Two postpartum women were prescribed rivaroxaban, one for stroke and the other for a pulmonary embolism. Each began therapy with 15 mg twice daily for 21 days, then 20 mg daily. Both patients provided several steady-state milk samples over the dosage interval during each regimen. After the 15 mg dose, a mean peak value of 300 mcg/L occurred 1 hour after the dose, and the average milk concentration was 160 mcg/L. The estimated daily dose that a fully breastfed infant would receive was 10 mcg/kg every 12 hours, which corresponded to 5% of the maternal weight-adjusted dosage. After the 20 mg dose, the mean peak value of 260 mcg/L occurred 2 hours after the dose and the average milk concentration was 70 mcg/L. The estimated daily dose that a fully breastfed infant would receive was 10 mcg/kg daily, which corresponded to 4% of the maternal weight-adjusted dosage.[5]

Two nursing mothers who were 8 months postpartum received a single oral dose of 20 mg of rivaroxaban. Blood and milk samples were obtained before the dose and at 2.5, 6, 10, 12, and 24 hours after the dose. The peak rivaroxaban milk level of about 90 mcg/L occurred at 2.5 hours after the dose. The average milk level over 24 hours was 28.9 mcg/L, which corresponds to a daily infant dosage of 4.3 mcg/kg daily and a relative infant dose of 1.63% of the maternal weight-adjusted dosage. The daily dosage of rivaroxaban in milk is about 0.7% of the estimated infant daily dosage required for anticoagulation.[6]

Two mothers receiving rivaroxaban 15 mg (0.22 and 0.25 mg/kg) daily beginning 3 days postpartum. Trough milk samples on day 5 postpartum taken just before a dose were 6.7 and 116.2 mcg/L; approximate peak milk samples taken 2 hours after breastfeeding were 39 and 59.2 mcg/L. These values were entered into a population pharmacokinetic model to obtain maternal plasma and milk pharmacokinetic parameters. Using a daily dosage of 150 mL/kg of milk, and the average concentrations of rivaroxaban in milk, the infants’ daily dosages would be 0.0018 and 0.0031 mg/kg, which translate into relative infant dosages of 0.82 and 1.27%, respectively in the two mothers’ infants.[7]

A physiologically based pharmacokinetic (PBPK) model was constructed to simulate breastmilk and infant rivaroxaban serum concentrations and compared to published data. The model predicted peak milk levels of 41, 77, 57 and 54 mcg/L for dosages of 10 mg daily, 15 mg daily, 20 mg daily and 15 mg twice daily, respectively. Results indicate that the worst-case relative infant dosage in infants would be about 7%.[2]

Twenty lactating women were given two doses of rivaroxaban 10 mg 24 hours apart. Milk was collected by self-expression or use of a hospital-grade breast pump at 0, 2, 4, and 6 hours after the second dose of rivaroxaban. The highest milk levels occurred at 2 hours after the dose and ranged from 22 to 171 mcg/L. Median concentrations at 0 (pre-second dose), 2, 4, and 6 hours were 4, 62, 47, and 34 mcg/L, respectively.[8] Based on the highest milk concentration reported, an exclusively breastfed infant would be exposed to approximately 25 mcg/kg daily, which is 3% of the 0.7 to 1 mg/kg daily dose range normally given to treat neonates with VTE.

A PBPK model that used experimentally derived values for protein binding and transmembrane passage was developed. Simulated RID values were about 1.4% using the average milk concentration and 4.55% using the peak concentrations as a worst-case value.[9]

Two women volunteered to take rivaroxaban 20 mg daily for 3 days and donate milk samples. The average milk concentration over 24 hours was 24.3 mcg/L resulting in an average infant intake of 3.64 mcg/kg daily or a relative infant dose of 1.2%. A physiologically based pharmacokinetic model accurately predicted the milk concentrations.[10]

Infant Levels. Three newborn infants (1 pair of twins) were breastfed by two mothers receiving rivaroxaban 15 mg daily (0.22 and 0.25 mg/kg daily) beginning 3 days postpartum. Infant blood samples on day 5 postpartum taken 2 hours after breastfeeding and 4 hours after the mothers’ daily doses contained undetectable (<2.5 mcg/L) levels of rivaroxaban.[7]

A physiologically based pharmacokinetic (PBPK) model that predicted milk levels well was used to simulate infant dosages. The predicted dosage was 0.02 mg/kg daily.[2]

### Effects in Breastfed Infants

A 38-year-old woman with antiphospholipid syndrome began rivaroxaban 15 mg (0.19 mg/kg) daily at 5 days postpartum for prophylaxis of deep vein thrombosis. She partially breast-fed her infant (at least 50%). No apparent evidence of bleeding was noted in the infant at 1- and 3-month check-ups and development was normal at 18 months of age.[4]

Two mothers received rivaroxaban 15 mg (0.22 and 0.25 mg/kg) daily beginning 3 days postpartum for prophylaxis of deep vein thrombosis. At 3 months postpartum, their infants continued to be breastfed (extent not stated) and had no health problems or bleeding events.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dabigatran, Dalteparin, Enoxaparin, Heparin, Warfarin

### References

1 Daei M, Khalili H, Heidari Z. Direct oral anticoagulant safety during breastfeeding: A narrative review. Eur J Clin Pharmacol 2021;77:1465-71.33963877
2 Butler AS, Cole S, Arya R, . Considerations of safety for women prescribed apixaban or rivaroxaban who breastfeed? - a physiologically based pharmacokinetic analysis. J Thromb Haemost 2026;24:520-9.41161415
3 Wiesen MH, Blaich C, Muller C, . The direct factor Xa inhibitor rivaroxaban passes into human breast milk. Chest 2016;150:e1-4.27396794
4 Saito J, Kaneko K, Yakuwa N, . Rivaroxaban concentration in breast milk during breastfeeding: A case study. Breastfeed Med 2019;14:748-51.31746638
5 Muysson M, Marshall K, Datta P, . Rivaroxaban treatment in two breastfeeding mothers: A case series. Breastfeed Med 2020;15:41-3.31532233
6 Zhao Y, Arya R, Couchman L, . Are apixaban and rivaroxaban distributed into human breast milk to clinically relevant concentrations? Blood 2020;136:1783-5.32488251
7 Yamashita Y, Hira D, Morita M, . Potential treatment option of rivaroxaban for breastfeeding women: A case series. Thromb Res 2024;237:141-4.38593524
8 Bruno AM, Job KM, Rower JE, . Prophylactic-dose rivaroxaban transfer into human milk. Obstet Gynecol 2026;147:e116-e9.41411660
9 Yi B, Bae SH, Yang Y, . Mechanistic prediction of apixaban and rivaroxaban secretion into human milk and infant systemic exposure through an integrated physiologically based pharmacokinetic framework. Drug Metab Dispos 2026;54:100271.42008899
10 Patel JP, Butler AS, Mackina G, . Can edoxaban and rivaroxaban be prescribed for breastfeeding mothers? - The New Horizons Clinical Trial. J Thromb Haemost 2026

## Substance Identification

### Substance Name

Rivaroxaban

### CAS Registry Number

366789-02-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Antithrombins